# Polyethylene Glycol

CASRN: 25322-68-3

## Drug Levels and Effects

### Summary of Use during Lactation

Polyethylene glycol is very poorly absorbed from the gastrointestinal tract, so it does not enter breastmilk.[1] No special precautions are required and it may be the laxative of choice during breastfeeding.[2,3]

### Drug Levels

Maternal Levels. Relevant published information was not found as of the revision date.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

(Constipation) Bisacodyl, Docusate, Magnesium Hydroxide, Psyllium, Sodium Phosphate; (Irritable Bowel Syndrome) Linaclotide, Lubiprostone, Plecanatide, Psyllium, Tenapanor

### References

1 Clowse ME, Förger F, Hwang C, et al. Minimal to no transfer of certolizumab pegol into breast milk: Results from CRADLE, a prospective, postmarketing, multicentre, pharmacokinetic study. Ann Rheum Dis 2017;76:1890-6 28814432
2 Lewis JH, Weingold AB and the Committee of FDA-Related Matters American College of Gastroenterology. The use of gastrointestinal drugs during pregnancy and lactation. Am J Gastroenterol 1985;80:912-23 2864852
3 Gharehbaghi K, Gharehbaghi DR, Wierrani F, et al. Treatment of chronic functional constipation during pregnancy and lactation. Z Geburtshilfe Neonatol 2016;220:9-15 26866689

## Substance Identification

### Substance Name

Polyethylene Glycol

### CAS Registry Number

25322-68-3

### Drug Class

Breastfeeding

Lactation

Milk, Human

Gastrointestinal Agents

Laxatives